# Milsaperidone

CASRN: 501373-88-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of milsaperidone during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Milsaperidone interconverts with iloperidone in vivo. They share common active metabolites.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who were not treated with a second-generation antipsychotic (n = 818). Of the patients who were taking a second-generation antipsychotic drug, 60.4% were on more than one psychotropic. A review of the pediatric medical records, no adverse effects were noted among infants exposed or not exposed to second-generation antipsychotic monotherapy or to polytherapy.[1] None of the patients were taking milsaperidone.

### Effects on Lactation and Breastmilk

Milsaperidone and iloperidone can cause increases in serum prolactin.[2,3] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who had primarily diagnoses of major depressive disorder and anxiety disorders, most often treated with SSRI or SNRI antidepressants, but not with a second-generation antipsychotic (n = 818). Among women on a second-generation antipsychotic, 60.4% were on more than one psychotropic compared with 24.4% among women in the control group. Of the women on a second-generation antipsychotic, 59.3% reported “ever breastfeeding” compared to 88.2% of women in the control group. At 3 months postpartum, 23% of women on a second-generation antipsychotic were exclusively breastfeeding compared to 47% of women in the control group.[1] None of the patients were taking milsaperidone.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Viguera AC, Vanderkruik R, Gaccione P, et al. Breastfeeding practices among women taking second-generation antipsychotics: Findings from the National Pregnancy Registry for Atypical Antipsychotics. Arch Womens Ment Health 2022;25:511–6.34318375
2 Cutler AJ. Iloperidone: A new option for the treatment of schizophrenia. Expert Rev Neurother 2009;9:1727–41.19951132
3 Weiden PJ, Cutler AJ, Polymeropoulos MH, et al. Safety profile of iloperidone: A pooled analysis of 6-week acute-phase pivotal trials. J Clin Psychopharmacol 2008;28 (2 Suppl 1):S12–9.18334908

## Substance Identification

### Substance Name

Milsaperidone

### CAS Registry Number

501373-88-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents